# Remimazolam

CASRN: 308242-62-8

## Drug Levels and Effects

### Summary of Use during Lactation

Although the manufacturer recommends that nursing mothers pump and discard breast milk for 5 hours after a dose, anesthesia guidelines recommend that breastfeeding can resume as soon as the mother has recovered sufficiently from general anesthesia to nurse.[1,2] This strategy was employed at one center with no infant sedation or adverse effects.[3] When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

In one center, five patients delivered during remimazolam exposure. All neonates had 1-min Apgar scores ≥7 with no signs of sedation or breastfeeding difficulty.[3]

### Alternate Drugs to Consider

(Intravenous Sedation) Dexmedetomidine, Etomidate, Methohexital, Midazolam, Propofol

### References

1 Reece-Stremtan S, Campos M, Kokajko L, . ABM Clinical Protocol #15: Analgesia and anesthesia for the breastfeeding mother, revised 2017. Breastfeed Med 2017;12:500-6.29624435
2 Mitchell J, Jones W, Morris S, . Guidelines for anaesthesia and sedation for patients who are breastfeeding: Guidelines from the Association of Anaesthetists. Anaesthesia 2026;81:685-701.41532178
3 Goyal A, Sharpe EE, Teixeira MT. Remimazolam use in obstetric patients: A single-center retrospective study (2021-2024). Int J Obstet Anesth 2025;64:104750.40974616

## Substance Identification

### Substance Name

Remimazolam

### CAS Registry Number

308242-62-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Benzodiazepines

Anesthetics, Intravenous